# Azficel-T

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of azficel-t during breastfeeding. However, azficel-t is a cellular material made from the patient's own fibroblast cells, so it would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Azficel-T

### Drug Class

Breast Feeding

Lactation

Milk, Human

Tissue Therapy